# Abrocitinib

CASRN: 1622902-68-4

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of abrocitinib during breastfeeding. The manufacturer recommends that breastfeeding be discontinued during abrocitinib therapy and for 1 day after the last dose.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Abrocitinib

### CAS Registry Number

1622902-68-4

### Drug Class

Breast Feeding

Lactation

Milk, Human

Enzyme Inhibitors

Protein Kinase Inhibitors

Signal Transduction Inhibitors

Janus Kinase Inhibitors

JAK Inhibitors